# Lisinopril

CASRN: 83915-83-7

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of lisinopril in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. Five women who were taking lisinopril and had donated milk samples to a breastmilk repository had their milk analyzed for lisinopril. Milk samples were collected under steady-state conditions at time intervals of 0, 1, 2, 4, 6, 8, 10, 12, and 24 hours after a dose. One woman was taking 5 mg daily, and two each were taking 10 and 20 mg daily. Milk lisinopril measurements were adjusted (doubled or halved) to a standard 10 mg daily dosage. The peak concentration of lisinopril was 0.63 mcg/L and occurred at an average of 4 hours after the dose. The average lisinopril concentration was 0.49 mcg/L, which corresponds to an infant daily dose of 0.073 mcg/kg daily and a relative infant dose of 0.06%.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Five women who were taking lisinopril reported any perceived adverse effects in their infants. Four taking doses of 5, 10 and 20 mg daily reported no adverse effects in their infants. One had taken 5 mg of lisinopril daily and breastfed her 1-year-old since birth, exclusive probably through 6 months and extensively thereafter. The fifth women reported that her infant’s “poop smelled unpleasant and was often green”, but she continued breastfeeding and taking lisinopril.[1] It is not clear if the infant’s condition was related to lisinopril.

### Effects on Lactation and Breastmilk

In a pilot study of the treatment of patients with postpartum hypertension, patients were randomized to either 12.5 mg hydrochlorothiazide plus 10 mg of lisinopril (n = 31) or 30 mg of nifedipine (n = 36) daily. The dosages could be increased to 12.5 mg hydrochlorothiazide plus 20 mg of lisinopril and then to 25 mg hydrochlorothiazide with 20 mg lisinopril. Nifedipine dosage was increased in 30 mg increments to a maximum daily dose of 120 mg daily. At discharge, 21 hydrochlorothiazide-lisinopril mothers (70%) were breastfeeding while19 nifedipine mothers (53%) were breastfeeding.[2]

### Alternate Drugs to Consider

Candesartan, Benazepril, Captopril, Enalapril, Quinapril, Valsartan

### References

1 Chugh J, Dai J, Datta P, et al. Investigating the transfer of lisinopril into human milk: A quantitative analysis. J Cardiovasc Pharmacol 2025;85:84–7.39405564
2 Fishel Bartal M, Blackwell SC, Pedroza C, et al. Oral combined hydrochlorothiazide and lisinopril vs nifedipine for postpartum hypertension: a comparative-effectiveness pilot randomized controlled trial. Am J Obstet Gynecol 2023;228:571.e1–.e10.

## Substance Identification

### Substance Name

Lisinopril

### CAS Registry Number

83915-83-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Angiotensin-Converting Enzyme Inhibitors

ACE Inhibitors

ACEIs